# Mesalamine

CASRN: 89-57-6

## Drug Levels and Effects

### Summary of Use during Lactation

Mesalamine is poorly excreted into breastmilk. However, rather high levels of the mesalamine metabolite N-acetyl-5-ASA appear in breastmilk and its effects on breastfed infants are unknown. A few cases of diarrhea have been reported in infants exposed to mesalamine, although the rate is not high. Most experts consider mesalamine derivatives to be safe during breastfeeding.[1-7] If mesalamine is required by the mother, it is not a reason to discontinue breastfeeding, but carefully observe breastfed infants for diarrhea during maternal use of mesalamine.

### Drug Levels

Mesalamine (5-aminosalicylic acid; 5-ASA) is metabolized to N-acetyl-5-ASA, which is inactive in treating inflammatory bowel disease, but the metabolite's possible effects on the breastfed infant are unknown.

Maternal Levels. One woman with ulcerative colitis (time postpartum not stated) was taking delayed-release tablets of mesalamine (Claversal) 500 mg orally 3 times daily. A single milk sample taken 5.25 hours after a dose contained 0.11 mg/L of mesalamine and 12.4 mg/L of N-acetyl-5-ASA.[8]

A woman with inactive ulcerative colitis was taking mesalamine (product not specified) 1 gram orally 3 times daily. A milk sample taken 1 week postpartum at 5 hours after a dose contained mesalamine 0.1 mg/L and N-acetyl-5-ASA 18.1 mg/L. Another milk sample taken 4 days later at 5 hours after a dose contained mesalamine 0.1 mg/L and N-acetyl-5-ASA 12.3 mg/L. The authors also report another mother taking 1 g of mesalamine daily (product not specified) who had a milk level of mesalamine that was undetectable and N-acetyl-5-ASA level of 2.2 mg/L (time of sampling and assay method not reported). The authors estimated that a fully breastfed infant whose mother was taking 1.5 grams of mesalamine daily would receive 0.015 mg/kg of mesalamine and 2.3 mg/kg of N-acetyl-5-ASA daily.[9]

Twelve women taking mesalamine in various oral dosage forms and one taking olsalazine capsules collected 1 to 8 breastmilk samples over one day at 2 to 4 weeks postpartum. Mesalamine was undetectable (< 20 mcg/L) in most women, but detected in the milk of 3 women; one was taking Pentasa tablets 1 gram 3 times daily and one was taking Pentasa suppositories 1 gram at night, and one was taking oral Asacol 400 mg twice daily plus Mesalal tablets 500 mg at night. Mesalamine milk levels ranged from 20 to 81 mcg/L. N-acetyl-5-ASA was detected in all milk samples, but there was no clear relationship between the dosages, times of the doses and the peak time in breastmilk. The individual average N-acetyl-5-ASA milk levels by product and dosage were Asacol tablets 800 mg daily, 0.24 mg/L (1 patient); Asacol tablets 800 mg daily plus Mesalal tablets 500 mg at night, 2.6 mg/L (1 patient); Mesalal tablets 500 mg daily, 0.75 mg/L (1 patient); Pentasa tablets 500 mg daily, 0.97 mg/L (1 patient); Pentasa tablets 1.5 grams daily, 2.8 to 6.5 mg/L (5 patients); Pentasa tablets 2 grams daily, 10.5 mg/L (1 patient); Pentasa tablets 3 grams daily, 10.2 mg/L (1 patient); Pentasa suppositories 1 gram daily, 1.9 mg/L (1 patient). Using the highest individual measured of 16.2 mg/L, the authors estimated that a fully breastfed infant would receive about 15 mg of N-acetyl-5-ASA daily, which is 1% of the usual daily dosage (not weight-adjusted) of mesalamine.[10]

Four women with inflammatory bowel disease who were breastfeeding during mesalamine use had breastmilk samples taken. Specific dosages and mesalamine products were not reported nor were sampling times with respect to the doses. Mesalamine milk levels ranged from 4 to 40 mcg/L and N-acetyl-5-ASA milk levels ranged from 5 to 14.9 mg/L. The authors calculated a daily dosage of mesalamine of 0.6 to 6 mcg/kg daily in an exclusively breastfed infant. However, the N-acetyl-5-ASA dosage would be about 1000 times greater. The authors speculated that mesalamine might be metabolized in the breast to N-acetyl-5-ASA in the breast tissue, but provided no direct evidence of this happening.[11]

Ten exclusively nursing mothers who were receiving long-term treatment for inflammatory bowel disease with a delayed-release form of mesalamine (2 Asacol HD, 8 Lialda) provided milk samples at 0, 1, 2, 4, 8, 12, and 24 hours after a dose. The women were 35 to 251 days postpartum, and their once-daily doses ranged from 1.2 to 4.8 grams. Milk mesalamine levels were highly variable among the participants and the N-acetyl-5-ASA metabolite was not measured. The average infant dosage was 15.7 mcg/kg daily (range 1.8 to 76.8 mcg/kg daily) and the mean percentage of weight-adjusted maternal dose was 0.02% (range 0.01 to 0.085%).[12]

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

A 6-week-old breastfed infant developed watery diarrhea 12 hours after the first maternal dose of mesalamine rectal suppositories 500 mg twice daily. The drug was stopped and reintroduced 4 times and each time the infant's diarrhea began 8 to 12 hours after the drug was started and ceased 8 to 12 hours after the drug was stopped. The infant's diarrhea was probably caused by mesalamine or it metabolite in breastmilk.[13]

A 4-month-old breastfed infant developed thrombosis of the superior sagittal sinus following severe thrombocytosis. The infant's mother was receiving oral mesalamine in dosages averaging 1 to 1.5 grams daily throughout pregnancy and lactation. Breastfeeding had been stopped abruptly 1 week prior to the thrombotic event. The authors ruled out other causes of thrombosis and hypothesized that the abrupt discontinuation of long-term mesalamine exposure caused the thrombocytosis and thrombosis in the infant. They rated the reaction as possibly caused by the drug.[14]

In a prospective telephone follow-up study, 8 nursing mothers reported taking mesalamine (dosage and route unspecified). One mother reported diarrhea in her infant. No other adverse reactions were reported in the infants by their mothers.[15]

A case-control study compared the infants of mothers taking mesalamine (n = 117; average dose, 2065 mg daily), olsalazine (n = 2) or sulfasalazine (n = 2) to infants of matched control mothers (n = 121) who were exposed to no treatment known to be harmful to a breastfed infant. Infants were exposed to mesalamine through milk for a mean of 5.3 months (range: 3 days-24 months). Infants were breastfed for an average of about 7.4 months and were followed up at an average age of about 22 months. No difference in the frequency or characteristics of maternally reported adverse events were found between exposed and control infants.[16,17]

Two women who developed inflammatory bowel disease were treated with mesalamine during pregnancy and postpartum. They breastfed their infants (extent not stated), one for 2 months and one for 10 months. Their breastfed infants had normal growth and development after 1 year of follow-up.[18]

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

(Inflammatory Bowel Disease) Adalimumab, Azathioprine, Budesonide, Certolizumab Pegol, Infliximab, Mesalamine, Olsalazine, Prednisone, Sulfasalazine

### References

1 Mahadevan U, Robinson C, Bernasko N, et al. Inflammatory bowel disease in pregnancy clinical care pathway: A report from the American Gastroenterological Association IBD Parenthood Project Working Group. Gastroenterology 2019;156:1508-24 30658060
2 Sammaritano LR, Bermas BL, Chakravarty EE, et al. 2020 American College of Rheumatology Guideline for the Management of Reproductive Health in Rheumatic and Musculoskeletal Diseases. Arthritis Rheumatol 2020;72:529-56 32090480
3 Yeung J, Gooderham MJ, Grewal P, et al. Management of plaque psoriasis with biologic therapies in women of child-bearing potential consensus paper. J Cutan Med Surg 2020;24 (1_Suppl):3S-14S 32500730
4 Russell MD, Dey M, Flint J, et al. British Society for Rheumatology guideline on prescribing drugs in pregnancy and breastfeeding: Immunomodulatory anti-rheumatic drugs and corticosteroids. Rheumatology (Oxford) 2023;62:e48-e88 36318966
5 Torres J, Chaparro M, Julsgaard M, et al. European Crohn's and Colitis Guidelines on Sexuality, Fertility, Pregnancy, and Lactation. J Crohns Colitis 2023;17:1-27 36005814
6 Rüegg L, Pluma A, Hamroun S, et al. EULAR recommendations for use of antirheumatic drugs in reproduction, pregnancy, and lactation: 2024 update. Ann Rheum Dis 2025;84:910-26 40287311
7 Mahadevan U, Seow CH, Barnes EL, et al. Global consensus statement on the management of pregnancy in inflammatory bowel disease. Clin Gastroenterol Hepatol 2025;23 (11S):S1-S60 40874901
8 Jenss H, Weber P, Hartmann F. 5-Aminosalicylic acid and its metabolites in breast milk during lactation. Am J Gastroenterol 1990;85:331 2309691
9 Klotz U, Harings-Kaim A. Negligible excretion of 5-aminosalicylic acid in breast milk. Lancet 1993;342:618-9 8102746
10 Christensen LA, Rasmussen SN, Hansen SH. Disposition of 5-aminosalicylic acid and N-acetyl-5-aminosalicylic acid in fetal and maternal body fluids during treatment with different 5-aminosalicylic acid preparations. Acta Obstet Gynecol Scand 1994;73:399-402 8009971
11 Silverman DA, Ford J, Shaw I, et al. Is mesalazine really safe for use in breastfeeding mothers? Gut 2005;54:170-1 15591526
12 Datta P, Rewers-Felkins K, Kallem RR, et al. Determination of mesalamine levels in human milk as a function of dose. Breastfeed Med 2019;14:98-101 30431332
13 Nelis GF. Diarrhoea due to 5-aminosalicylic acid in breast milk. Lancet 1989;333:383 2563532
14 Barriuso LM, Yoldi-Petri ME, Olaciregui O, et al. Thrombosis of the superior sagittal sinus in a breast fed infant: Secondary to prolonged exposure to mesalazine? Rev Neurol 2003;36:1142-4 12833232
15 Ito S, Blajchman A, Stephenson M, et al. Prospective follow-up of adverse reactions in breast-fed infants exposed to maternal medication. Am J Obstet Gynecol 1993;168:1393-9 8498418
16 Moretti ME, Spiczynski Y, Hashemi G, et al. Prospective follow-up of infants exposed to 5-aminosalicylic acid containing drugs through maternal milk. J Clin Pharmacol 1998;38:867.doi:10.1177/009127009803800901
17 Moretti ME. Prospective follow-up of infants exposed to 5-aminosalicylic acid containing drugs through maternal milk. Theses Canada 1998. https://library-archives.canada.ca/eng/services/services-libraries/theses/Pages/item.aspx?idNumber=51446896
18 Xu YL, Tan B, Ma LK, et al. Inflammatory bowel disease in pregnancy: A report of 7 cases and review of the literature. Int J Clin Exp Med 2017;10:5525-32. http://www.ijcem.com/V10_No3.html

## Substance Identification

### Substance Name

Mesalamine

### CAS Registry Number

89-57-6

### Drug Class

Breast Feeding

Lactation

Milk, Human

Gastrointestinal Agents

Anti-Inflammatory Agents, Non-Steroidal